# Lurasidone

CASRN: 367514-87-2

## Drug Levels and Effects

### Summary of Use during Lactation

Lurasidone is more than 99% bound to plasma proteins, so it is unlikely that the drug would be excreted into milk in sufficient amounts to affect a breastfed infant. Data from one mother-infant pair appears to support the poor excretion into milk and lack of effect on the breastfed infant. Until more data are available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.[1]

### Drug Levels

Maternal Levels. A woman with depressive type schizoaffective disorder was taking lurasidone 40 mg at night and desvenlafaxine 50 mg daily after giving birth. She exclusively breastfed her infant and provided milk samples on days 5 and 41 postpartum. Her milk lurasidone level was 16 mcg/L on day 5 at 3 hours and 15 minutes after the dose and 2.2 mcg/L on day 41 at 18 hours and 23 minutes after her dose.[2]

Seven mothers taking lurasidone donated milk samples before and at 1, 2, 4, 6, 8, 10, 12, and 24 hours after a dose. Two more provided samples before and at 1, 2, and 24 hours after a dose. Doses ranged from 20 to 80 mg daily, so milk concentrations of lurasidone were standardized to a dose of 40 mg daily. The peak milk concentration occurred at 2 hours after the dose and the mean concentration of all the samples was 39.5 mcg/L after the adjustment. The daily infant dosage would be 6 mcg/kg with a dose of 40 mg leading to an RID of 1.16%. As a worst case using the highest concentration measured in a woman taking 80 mg daily, the RID was 3%.[3]

Infant Levels. A woman with depressive type schizoaffective disorder was taking lurasidone 40 mg at night and desvenlafaxine 50 mg daily after giving birth. She exclusively breastfed her infant and on day 5 postpartum, an infant serum sample was obtained. At 5 hours after the mother’s dose, the infant had a lurasidone serum concentration of 0.05 mcg/L, which was 1.4% of the mother’s serum level.[2]

### Effects in Breastfed Infants

A woman with depressive type schizoaffective disorder was taking lurasidone 40 mg at night and desvenlafaxine 50 mg daily after giving birth. She exclusively breastfed her infant. The infant’s growth and development was good during a follow-up period of 39 days.[2]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[4] The number of women taking lurasidone was not reported.

In a pharmacokinetic study of 9 nursing mothers taking lurasidone 20 to 80 mg daily during breastfeeding, five breastfed infants were under 6 months and four ranged in age from 7 to 24 months. Three mothers reported common minor issues such as colic, diarrhea and growth or weight faltering. However, the mothers reported no adverse effects in their infants, all infants’ development met or exceeded guidelines.[3]

### Effects on Lactation and Breastmilk

Increases in serum prolactin with lurasidone are generally infrequent, small and less than risperidone.[5,6] However, breast engorgement, galactorrhea, and breast discharge have been reported.[7] A woman with elevated serum prolactin, breast tenderness and galactorrhea while taking risperidone improved when lurasidone was substituted for risperidone and these side effects subsided completely when the lurasidone dose was increased from 20 mg to 40 mg daily.[8] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[4] The number of women taking lurasidone was not reported.

A 14-year-old girl with hallucinatory schizophrenia was treated inadequately with aripiprazole, then paliperidone. As she was transitioned from paliperidone to lurasidone at age 16 years, her serum prolactin increased to 4240 mIU/L (normal range 60-400 mIU/L). As the lurasidone dose was titrated to a maximum of 111 mg daily, prolactin levels continued to increase and the patient experienced breast fullness and galactorrhea. Six of 7 serum prolactin measurements were in the range of 4240 to 6140 mIU/L. Once lurasidone was discontinued, her serum prolactin normalized.[9]

In an Italian study of treatment of schizophrenic patients with lurasidone, 2.4% of patients developed hyperprolactinemia and galactorrhea.[10]

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 McAllister-Williams RH, Baldwin DS, Cantwell R, et al. British Association for Psychopharmacology consensus guidance on the use of psychotropic medication preconception, in pregnancy and postpartum 2017. J Psychopharmacol 2017;31:519–52.28440103
2 Keightley P, Schmidt Sotomayor N, O'Hara K, et al. Lurasidone in lactation: A case study with laboratory and clinical outcomes. Aust N Z J Psychiatry 2020;54:1035–6.32611245
3 Campbell LS, Datta P, Krutsch K. Balancing mental health and breastfeeding: Evaluating the transfer of lurasidone into human milk. J Clin Psychiatry 2025;86:25m15955.
4 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511–6.34318375
5 Feng Y, Shi J, Wang L, et al. Randomized, double-blind, 6-week non-inferiority study of lurasidone and risperidone for the treatment of schizophrenia. Psychiatry Clin Neurosci 2020;74:336–43.31823444
6 Mattingly GW, Haddad PM, Tocco M, et al. Switching to lurasidone following 12 months of treatment with risperidone: Results of a 6-month, open-label study. BMC Psychiatry 2020;20:199.32370778
7 Luo Z, Zhang M, Liang W, et al. The safety analysis of lurasidone based on the real-world data of FAERS database. Expert Opin Drug Saf 2025 40266634
8 Agapoff JR 4th, Olson DJ, White S, et al. Rapid and sustained resolution of risperidone associated hyperprolactinemia and galactorrhea with low-dose lurasidone. J Clin Psychopharmacol 2020;40:410–2.32555004
9 Gjessing Jensen K. Severe hyperprolactinemia during lurasidone treatment in a 16-year old girl with schizophrenia - a case report. Scand J Child Adolesc Psychiatr Psychol 2022;10:87–8.35903553
10 Fagiolini A, Olivola M, Lavatelli L, et al. Treatment persistence in patients with schizophrenia treated with lurasidone in Italian clinical practice. Ann Gen Psychiatry 2022;21:49.36527022

## Substance Identification

### Substance Name

Lurasidone

### CAS Registry Number

367514-87-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents